# Oxygen-15

CASRN: 13982-43-9

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of oxygen-15 radiopharmaceuticals as diagnostic agents. United States and international authorities state that breastfeeding need not be interrupted after administration of radiopharmaceuticals containing oxygen-15.[1,2]

### Drug Levels

Oxygen 15 decays by positron emission with a half-life of 2.04 minutes.[2]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44:7-321.26069086
2 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf

## Substance Identification

### Substance Name

Oxygen-15

### CAS Registry Number

13982-43-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Oxygen Radioisotopes

Diagnostic Agents